# Fexofenadine

CASRN: 83799-24-0

## Drug Levels and Effects

### Summary of Use during Lactation

Because of its lack of sedation and low milk levels, maternal use of fexofenadine would not be expected to cause any adverse effects in breastfed infants. Fexofenadine might have a negative effect on lactation, especially in combination with a sympathomimetic agent such as pseudoephedrine.

### Drug Levels

Fexofenadine is an active metabolite of terfenadine.

Maternal Levels. Milk levels have not been measured after fexofenadine administration. However, after 60 mg every 12 hours orally of its parent compound, terfenadine, peak steady-state fexofenadine milk levels averaged 41 mcg/L (range 23 to 60 mcg/L). Based on the data on drug passage into breastmilk in this study and the typical serum levels found after fexofenadine administration, an exclusively breastfed infant would receive less than 0.1% of the weight-adjusted maternal dosage of fexofenadine.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In one telephone follow-up study of 25 infants exposed to the fexofenadine's parent drug terfenadine, 3 mothers reported irritability in their infants. None of the reactions required medical attention.[2]

### Effects on Lactation and Breastmilk

Antihistamines in relatively high doses given by injection can decrease basal serum prolactin in nonlactating women and in early postpartum women.[3,4] However, suckling-induced prolactin secretion is not affected by antihistamine pretreatment of postpartum mothers.[3] Whether lower oral doses of antihistamines have the same effect on serum prolactin or whether the effects on prolactin have any consequences on breastfeeding success have not been studied. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Cetirizine, Desloratadine, Levocetirizine, Loratadine

### References

1 Lucas BD, Jr, Purdy CY, Scarim SK, et al. Terfenadine pharmacokinetics in breast milk in lactating women. Clin Pharmacol Ther 1995;57:398-402.7712667
2 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418
3 Messinis IE, Souvatzoglou A, Fais N, et al. Histamine H1 receptor participation in the control of prolactin secretion in postpartum. J Endocrinol Invest 1985;8:143-6.3928731
4 Pontiroli AE, De Castro e Silva E, Mazzoleni F, et al. The effect of histamine and H1 and H2 receptors on prolactin and luteinizing hormone release in humans: Sex differences and the role of stress. J Clin Endocrinol Metab 1981;52:924-8.7228996

## Substance Identification

### Substance Name

Fexofenadine

### CAS Registry Number

83799-24-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihistamines

Nonsedating Antihistamines